# Nefopam

CASRN: 13669-70-0

## Drug Levels and Effects

### Summary of Use during Lactation

Nefopam is not approved in the United States by the Food and Drug Administration. The amount of nefopam in breastmilk with usual maternal dosages is small. Nefopam does not appear to adversely affect the milk supply or the neurobehavioral scores of breastfed neonates. Breastfeeding is acceptable during maternal use of nefopam, although some recommend not using it after 48 hours postpartum.[1]

### Drug Levels

Maternal Levels. Human milk and plasma samples were obtained from 5 nursing mothers who were taking nefopam hydrochloride 60 mg every 4 hours for post-episiotomy pain. Samples of breastmilk were collected at 5 variable times over about 100 hours after the first dose. Milk concentrations varied from 6 to 299 mcg/L. The authors calculated that the highest dosage that a fully breastfed infant would receive would be about 50 mcg/kg daily or less than 3% of the weight-adjusted maternal dosage.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Sixty-six women who had cesarean section deliveries were two groups postpartum: intravenous (IV) nefopam 20 mg every 6 hours or IV acetaminophen 1 gram every 6 hours as well as IV ketoprofen 50 mg every 6 hours in both groups Neonatal neurobehavioral scores were recorded at 12, 24, 48, and 72 hours post-caesarean by a pediatrician blinded to the group allocation. No difference was found between the groups in the behavioral scores.[3]

### Effects on Lactation and Breastmilk

Sixty-six women who had cesarean section deliveries were two groups: IV nefopam 20 mg every 6 hours or IV acetaminophen 1 gram every 6 hours. All women received the same preoperative analgesia consisting of spinal bupivacaine, sufentanil, and morphine as well as intravenous ephedrine and phenylephrine to prevent hypotension. Postoperatively, all received IV oxytocin by infusion and IV ketoprofen 50 mg every 6 hours. Milk production was assessed by weighing the newborn before and after each breastfeed on days 2 and 3. No statistical differences were seen between the two groups in the weight difference before and after each feed, the newborn daily weight curve evolution, or the fall in weight between days 0 and 2. Mothers also rated their breast fullness to assess the onset of lactogenesis II; no difference was found between the two groups in the time to lactogenesis II. There was also no difference in serum prolactin between the groups.[3]

### References

1 Marcellin L, Chantry AA. Breast-feeding (part IV): Therapeutic uses, dietetic and addictions--guidelines for clinical practice. J Gynecol Obstet Biol Reprod (Paris) 2015;44:1091-100.26530179
2 Liu DT, Savage JM, Donnell D. Nefopam excretion in human milk. Br J Clin Pharmacol 1987;23:99-101.3814467
3 Baka NE, Vial F, Iohom G, et al. The effect of nefopam on lactation after caesarean section: A single-blind randomised trial. Int J Obstet Anesth 2017;31:84-90.28347572

## Substance Identification

### Substance Name

Nefopam

### CAS Registry Number

13669-70-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Non-Narcotic